# Metformin

CASRN: 657-24-9

## Drug Levels and Effects

### Summary of Use during Lactation

Data from well-conducted studies indicate that metformin levels in milk are low and infants would receive less than 0.5% of their mother’s weight-adjusted dosage. Milk metformin levels are relatively constant during maternal metformin use, so timing of breastfeeding with respect to the administration times is of little benefit. Although the dose in milk is low, metformin is sometimes detectable in low levels in the serum of breastfed infants. One sizeable prospective study found no adverse effects in breastfed infants. Metformin is sometimes used as a galactogogue in women with reduced milk supply, but there is no evidence that it is effective. Metformin should be used with caution while nursing newborn and premature infants and those with renal impairment.

### Drug Levels

Maternal Levels. Seven women (time postpartum not stated) were taking metformin with a median dose of 1500 mg daily (14 mg/kg daily; range 6.9 to 20 mg/kg daily) orally. Six of the women were taking an immediate-release product 500 mg three times daily and one was taking 500 mg as a sustained-release product once daily. Six women had milk levels that varied little over 24 hours and averaged 270 mcg/L. One woman had a slight rise in the milk level to about 380 mcg/L at about 4 to 5 hours after the dose. The authors estimated that an exclusively breastfed infant would receive an average daily dosage of 0.04 mg/kg (range 0.02 to 0.06 mg/kg) or 0.28% (range 0.16 to 0.4%) of the maternal weight-adjusted dosage with this maternal dosage regimen.[1,2]

Two lactating women who were 14 and 14.5 months postpartum took a single dose of 500 mg of immediate-release metformin. Milk levels were relatively constant over the next 72 hours with average levels of 130 and 270 mcg/L; a slight peak occurred in one mother 12 hours after the dose. The authors estimated that their infants received 0.11 and 0.25% of the maternal weight-adjusted dosage. Three other mothers were studied in the same way for 12 or 24 hours and had results consistent with the 2 more completely studied mothers.[3]

In the same paper, 3 women who had been taking immediate-release metformin 500 mg twice daily orally for at least several days were studied. Relatively stable milk levels averaging 130 to 270 mcg/L in the 3 mothers was found. The authors estimated that an exclusively breastfed infant would receive an average daily dosage of 29 mcg/kg (range 20 to 41 mcg/kg) or 0.2% (range 0.18 to 0.21%) of their mother’s weight-adjusted dosage with this dosage regimen.[3]

Five women began metformin 500 mg twice daily on the first day postpartum. Trough and peak (2 hours after the dose) milk levels were collected 4 to 17 days postpartum. The average milk metformin levels were estimated to be 410 mcg/L. The authors estimated that an exclusively breastfed infant would receive an average of 0.65% of the maternal weight-adjusted dosage.[4]

Four women who were taking metformin during pregnancy and lactation provided breastmilk samples at 2- to 3-hour intervals over one dosage interval using a breast pump and emptying both breasts at each sampling time. The total amount of metformin excreted into milk was 0.13 mg with 1.5 grams daily (n = 1) and an average of 0.21 mg with 2 grams daily (n = 3). These values corresponded to daily infant dosages ranging from 0.024 to 0.050 mg/kg and an average of 0.25% (range 0.14 to 0.43%) of the weight-adjusted maternal dosage.[5]

Infant Levels. Serum levels were measured in 4 breastfed infants (ages and extent of nursing not stated) whose mothers were taking a median metformin dosage of 1.5 grams daily. In 2, metformin was undetectable (<10 mcg/L) 2.5 hours after the maternal dose, while in the other 2, levels of 50 and 80 mcg/L (10 and 15% of their mother’s serum levels) were found at 6 and 5.3 hours after the maternal dose, respectively.[1,2]

Three women 2, 5 and 14 months postpartum who had been taking immediate-release metformin 500 mg twice daily orally for at least several days were studied. Metformin was undetectable (<5 mcg/L) in the serum of the 2 infants (extent of nursing not stated) aged 2 and 14 months in whom it was measured.[2]

### Effects in Breastfed Infants

Seven infants aged 5 to 25 months whose mothers were taking metformin (start date and duration not stated) were judged to be healthy with growth and development progressing as expected. Two of the infants also had normal Denver Developmental Screening tests.[1]

Three infants aged 2, 5 and 14 months whose mothers were taking metformin 500 mg twice daily had no detectable adverse effects from metformin.[3]

In 3 breastfed (extent not stated) infants aged 10 to 11 days postpartum whose mothers were taking an average metformin dosage of 9.6 mg/kg (range 7.5 to 12.4 mg/kg) daily, none of the infants had low blood glucose levels. Their mothers reported no adverse reactions in the infants.[4]

Ninety-two mothers of 111 infants were treated with metformin in a mean dosage of 2.2 grams daily (range 1.5 to 2.55 mg daily) throughout pregnancy and postpartum. A 6-month, nonrandomized, prospective trial followed 61 predominantly breastfed and 50 formula-fed infants of these women. No differences in 3- and 6-month outcomes were found by blinded observers between the 2 groups of infants in height, weight, motor-social development or rates of illness.[6]

### Effects on Lactation and Breastmilk

In a retrospective study of 250 women who received metformin 500 mg to 2 grams daily in either the immediate- or extended-release formulation for polycystic ovary syndrome, information on breastfeeding was available on 164 women. Of these, 97 (59%) were successful at breastfeeding, 27 (17%) failed, and 40 (27%) made no attempt to breastfeed. Of the 124 who attempted to breastfeed, 78% were successful. Failures were attributed to poor milk production in 4 women, demands of multiple births, infant prematurity, cleft palate and mastitis. Most of the women stopped metformin by the 12^th^ week of pregnancy.[7]

In a follow-up to a placebo-controlled study on metformin use during pregnancy in women with polycystic ovary syndrome, women were asked about the duration and extent of breastfeeding. No difference in breastfeeding in the duration of exclusive or partial breastfeeding was observed between the women who received metformin during pregnancy and those who received placebo.[8]

A small pilot study of women with low milk supply and at least one sign of insulin resistance were randomized to receive metformin (n = 10) or placebo (n = 5). Metformin (Glucophage XR) was given in doses that increased at weekly intervals from 750 mg to 1.5 grams to 2 grams daily. Milk output was determined by weighing their infants before and after feeding plus the weight of any pumped milk. At 2 to 4 weeks of the study, women given placebo had a reduction of 58 mL daily while those who received metformin increased their milk output by 8 mL daily; however this difference was not statistically significant.[9]

A retrospective cohort study in Norway compared women with polycystic ovary disease (PCOS) who received metformin (n = 653) to women in a large cohort who did not have PCOS. The study showed no difference in exclusive breastfeeding between metformin- and placebo-treated women with PCOS. Hypertensive disorders and gestational diabetes did not affect the exclusive breastfeeding rate in PCOS.[10]

### Alternate Drugs to Consider

Acarbose, Colesevelam, Glipizide, Glyburide, Insulin, Miglitol, Semaglutide, Tirzepatide

### References

1 Hale TW, Kristensen JH, Hackett LP, . Transfer of metformin into human milk. Diabetologia 2002;45:1509-14.12436333
2 Hale T, Kristensen J, Hackett L, . Transfer of metformin into human milk. Adv Exp Med Biol 2004;554:435-6.15384618
3 Gardiner SJ, Kirkpatrick CM, Begg EJ, . Transfer of metformin into human milk. Clin Pharmacol Ther 2003;73:71-7.12545145
4 Briggs GG, Ambrose PJ, Nageotte MP, . Excretion of metformin into breast milk and the effect on nursing infants. Obstet Gynecol 2005;105:1437-41.15932841
5 Eyal S, Easterling TR, Carr D, . Pharmacokinetics of metformin during pregnancy. Drug Metab Dispos 2010;38:833-40.20118196
6 Glueck CJ, Salehi M, Sieve L, . Growth, motor, and social development in breast- and formula-fed infants of metformin-treated women with polycystic ovary syndrome. J Pediatr 2006;148:628-32.16737874
7 Thatcher SS, Jackson EM. Pregnancy outcome in infertile patients with polycystic ovary syndrome who were treated with metformin. Fertil Steril 2006;85:1002-9.16580387
8 Vanky E, Nordskar J, Leithe H, . Breast size increment during pregnancy and breastfeeding in mothers with polycystic ovary syndrome: A follow-up study of a randomised controlled trial on metformin versus placebo. BJOG 2012;119:1403-9.22827167
9 Nommsen-Rivers L, Thompson A, Riddle S, . Feasibility and acceptability of metformin to augment low milk supply: A pilot randomized controlled trial. J Hum Lact 2019;35:261-71.30629889
10 Husby AE, Simpson MR, Dalbye R, . Exclusive breastfeeding among women with polycystic ovary syndrome versus women from a population-based cohort: A cohort study. Int Breastfeed J 2026;21:54.42010413

## Substance Identification

### Substance Name

Metformin

### CAS Registry Number

657-24-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Biguanides